# Pimavanserin

CASRN: 706779-91-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of pimavanserin during breastfeeding. If pimavanserin is required by the mother, it is not a reason to discontinue breastfeeding. However, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Haloperidol, Olanzapine, Quetiapine, Risperidone

## Substance Identification

### Substance Name

Pimavanserin

### CAS Registry Number

706779-91-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiparkinson Agents

Antipsychotic Agents

Serotonin 5-HT2 Receptor Antagonists